# Coleus

## Drug Levels and Effects

### Summary of Use during Lactation

Coleus amboinicus (Plectranthus amboinicus) leaves are a traditional galactogogue used in Indonesia called torbangun or bangun-bangun in the local languages.[1] Human studies of poor quality indicate that it might have some efficacy as a galactogogue, but the studies are inadequate to establish activity.[2-4] A meta-analysis of studies (many in Malaysian) found that torbangun supplementation may increase breastmilk volume, but its effect on infant weight gain remains uncertain.[5] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[6,7] No data exist on the excretion of any components of Coleus amboinicus into breastmilk or on the safety and efficacy of Coleus amboinicus in nursing mothers or infants, although it has been used for hundreds of years in Indonesia with apparent safety. A related plant, Coleus forskohlii, is well tolerated as a supplement. One nursing mother using torbangun, fenugreek and goat’s rue as galactogogues developed slightly elevated liver transaminases that reversed when goat’s rue and torbangun were discontinued.[8]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A study of 67 healthy women who delivered a fullterm infant and desired to breastfeed for at least 4 months compared torbangun (Coleus amboinicus), fenugreek, and a control product containing placental extract and vitamin B12 (Molocco+B12) for their effects on breastmilk volume. No mention was made of any breastfeeding support provided to the women. Participants were randomly assigned to receive one of the products for 30 days and followed for another 30 days. A soup was made from 150 grams of Coleus amboinicus leaves 6 days per week for 30 days, beginning on the second postpartum day, and it was consumed during the day. Infants were weighed before and after each nursing at 2-week intervals during the study to measure 24-hour milk volume. In the torbangun group, the milk volume on day 28 was statistically greater than on day 14. The increase in milk volume on day 28 was 33% in the torbangun group, compared to a decrease of 15% in the control group and a decrease of 14% in the fenugreek group. However, the baseline production in the torbangun group was 20 to 23% lower than in the other groups and there was no statistical difference in milk volume at any time compared to the initial volume of milk in the control group. Analysis of breastmilk found no decrease in nutritional quality of milk in the torbangun group.[9]

A nonrandomized, unblinded study in Indonesia gave some mothers Coleus amboinicus leaves as a soup and other mothers nothing for 7 days after delivery. Based on maternal surveys, those who ingested Coleus appeared to produce milk a few hours sooner than those who did not (average 2.37 vs 3 days) and supplement their infants less frequently.[4]

A nonblinded study in Indonesia randomized postpartum women with perceived low milk supply to either an herbal decoction containing 25 grams Sauropus androgynus (katuk) leaves, 10 grams Coleus amboinicus (torbangun) leaves and 5 grams papaya leaves (n = 60) or to 500 mg Sauropus androgynus extract (CV Al-Ghuroba, Indonesia; n = 60). Patients were to take the product and weigh their infant twice daily for 28 days. Maternal serum prolactin was measured on day 14 and 28. Breast milk volume and infant’s weight increased on days 14 and 28, and serum prolactin levels in decreased in both groups; however, the changes were not statistically significant. Mean infant weights increased, with no difference between the two treatments. Two mothers in the combination group and 3 in the extract group had increases in aspartate aminotransferase and/or alanine aminotransferase.[10]

### References

1 Damanik R. Torbangun (Coleus amboinicus lour): A Bataknese traditional cuisine perceived as lactagogue by Bataknese lactating women in Simalungun, North Sumatera, Indonesia. J Hum Lact 2009;25:64-72.18984829
2 Mortel M, Mehta SD. Systematic review of the efficacy of herbal galactogogues. J Hum Lact 2013;29:154-62.23468043
3 Zapantis A, Steinberg JG, Schilit L. Use of herbals as galactagogues. J Pharm Pract 2012;25:222-31.22392841
4 Nasution SS, Eliana R, Aizar E, . Effectiveness of Coleus amboinicus consumption interventions in increasing breast milk production and improving maternal health status during COVID 19 pandemic. Open Access Macedonian J Med Sci 2022;10:202-8. doi:10.3889/oamjms.2022.7094
5 Sayuti NA, Atikah N, Murwati. The effectiveness of torbangun (Coleus amboinicus) in promoting successful breastfeeding: A systematic review. Adv Public Health 2026;2026:2026:9788556. doi:10.1155/adph/9788556
6 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
7 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
8 Derdikman Ofir Y, Eglash A, Moberg KU, . Breastfeeding in panhypopituitarism: A case report, review of the literature, and management checklist. Int Breastfeed J 2026;30:923-33.
9 Damanik R, Wahlqvist ML, Wattanapenpaiboon N. Lactagogue effects of Torbangun, a Bataknese traditional cuisine. Asia Pac J Clin Nutr 2006;15:267-74.16672214
10 Zulkarnain Z, Fitriani U, Ardiyanto D, . Galactagogue activity of poly-herbal decoction from Indonesia: A randomized open label controlled trial. J Complement Integr Med 2024;21:532-9.38644615

## Substance Identification

### Substance Name

Coleus

### Scientific Name

Coleus amboinicus

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal